# Trientine

CASRN: 112-24-3

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that trientine is not detectable in breastmilk, and no adverse effects have been reported among breastfed infants whose mothers were taking the drug. The effect of trientine on breastmilk copper and zinc concentrations in milk is somewhat conflicting,[1-4]but breastfed infants appear to have normal serum copper and zinc plasma levels. Based on available data, it appears that trientine is acceptable to use during breastfeeding.

### Drug Levels

Maternal Levels. Four patients received trientine for Wilson's disease in dosages of 1000, 1500 (2 patients) and 1750 mg daily. Trientine was not detectable by HPLC in the breastmilk of any of the mothers' milk samples.[3]

Six patients with Wilson’s disease were taking trientine in dosages of 1000 to 1750 mg daily. Trientine-copper complex was not detected in any milk samples.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Three infants were breastfed during maternal treatment of Wilson's disease with trientine. Serum zinc and copper concentrations were normal in these infants.[1]

A center in Türkiye reported 23 infants born to mothers with Wilson's disease over a 20-year period. One patient was treated with 600 mg of trientine plus 100 mg of zinc daily. All of the infants were breastfed (extent and duration not specified). One premature infant died at 3 weeks of age (maternal drug not specified), but the other infants had no apparent complications over a median of 51 months (range 13 to 105 months) of follow-up.[5]

A center in Germany reports 32 patients with Wilson's disease who became pregnant. Four of the patients were taking trientine in dosages of 600 to 1200 mg daily. Of the 31 women who delivered a live infant, 27 of them breastfed their infants (extent not stated). Four of the infants had neonatal jaundice, but its relationship to trientine cannot be determined. The exact number of women who breastfed while taking trientine is unclear in the report.[6]

Six patients with Wilson’s disease were taking trientine in dosages of 1000 to 1750 mg daily and breastfed their infants. Maternal reports indicate that all infants exhibited normal development.[4]

### Effects on Lactation and Breastmilk

Conflicting data exist on breastmilk concentrations of zinc and copper during therapy of Wilson's disease with trientine. One abstract reported that breastmilk concentrations were normal during therapy,[2] but another abstract from the same authors reported lower milk concentrations of zinc and copper.[3]

A more recent study compared copper and zinc concentration in the milk of 6 mothers taking trientine compared to 25 control mothers without Wilson’s disease. The zinc concentration in the colostrum (0-4 days postpartum) from one mother treated with trientine was higher than normal. In the colostrum from another mother treated with trientine, the zinc concentration was normal. The copper concentration in transitional milk was slightly lower in a mother treated with trientine and a mother treated with zinc compared with the minimum levels in the control samples. Copper and zinc concentrations were normal in mature breastmilk (>14 days postpartum) from all mothers treated with trientine, despite the low copper concentrations in maternal serum.[4]

### Alternate Drugs to Consider

Penicillamine

### References

1 Shiga K, Kaga H, Kodama H, et al. Copper and zinc concentrations in the breast milk of mothers with Wilson disease and effects on infants. J Inherit Metab Dis 2006;29 (Suppl. 1):139. doi:10.1007/s10545-006-9995-6
2 Kaga F, Kodama H, Shiga K, et al. Copper and zinc status in the breast milk of mothers with Wilson disease. J Inherit Metab Dis 2008;31 (Suppl. 1):157. doi:10.1007/s10545-008-9975-0
3 Izumi Y. Can mothers with Wilson's disease give her breast milk to their infant? Teikyo Med J 2012;35:17-24.
4 Kodama H, Anan Y, Izumi Y, et al. Copper and zinc concentrations in the breast milk of mothers undergoing treatment for Wilson’s disease: A prospective study. BMJ Paediatr Open 2021;5:e000948.34222678
5 Demir K, Soyer OM, Karaca C, et al. The course of pregnancy in Wilson's disease-one center, 20 years' experience. Gastroenterology 2014;146:S-1009. doi:10.1016/S0016-5085(14)63671-4
6 Reuner U, Dinger J. Pregnancy and Wilson disease: Management and outcome of mother and newborns-experiences of a perinatal centre. Ann Transl Med 2019;7 (Suppl 2):S56.31179293

## Substance Identification

### Substance Name

Trientine

### CAS Registry Number

112-24-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Chelating Agents